# Olaratumab

CASRN: 1024603-93-7

## Drug Levels and Effects

### Summary of Use during Lactation

Olaratumab is no longer marketed in the United States. No information is available on the clinical use of olaratumab during breastfeeding. Because olaratumab is a large protein molecule with a molecular weight of about 154,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] However, olaratumab is given with doxorubicin. The manufacturer recommends that women should not breastfeed during treatment with olaratumab and for 3 months following the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Olaratumab

### CAS Registry Number

1024603-93-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal